# Botulism Antitoxin

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of botulism antitoxin during breastfeeding. Because it is a mixture of large protein molecules, the amounts in milk are likely to be very low.[1] They are also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Breastfeeding can continue while receiving botulinum antitoxin. Monitor breastfed infants for signs of adverse impacts from botulinum antitoxin including flu-like symptoms, such as fevers, chills, and malaise.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Botulism Antitoxin

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antidotes

Antivenins